# Glycopyrrolate

CASRN: 596-51-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of glycopyrrolate during breastfeeding. Because glycopyrrolate is a quaternary ammonium compound, it is not likely to be absorbed and reach the bloodstream of the infant, especially when given by inhalation or topically on the skin.[1-3] Long-term oral use of glycopyrrolate might reduce milk production or milk letdown, but a single dose is unlikely to interfere with breastfeeding. During long-term use, observe for signs of decreased lactation such as poor weight gain. The inhaled form of glycopyrrolate has not been studied, but is unlikely to cause effects in the breastfed infant or on milk production.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. Anticholinergics can inhibit lactation in animals, apparently by inhibiting growth hormone and oxytocin secretion.[4-8] Anticholinergic drugs can also reduce serum prolactin in nonnursing women.[9] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Hale TW. Anesthetic medications in breastfeeding mothers. J Hum Lact 1999;15:185-94.10578796
2 Lee JJ, Rubin AP. Breast feeding and anaesthesia. Anaesthesia 1993;48:616-25.8346780
3 Dalal PG, Bosak J, Berlin C. Safety of the breast-feeding infant after maternal anesthesia. Paediatr Anaesth 2014;24:359-71.24372776
4 Powell MR, Keisler DH. A potential strategy for decreasing milk production in the ewe at weaning using a growth hormone release blocker. J Anim Sci 1995;73:1901-5.7592071
5 Aaron DK, Ely DG, Deweese WP, et al. Reducing milk production in ewes at weaning using restricted feeding and methscopolamine bromide. J Anim Sci 1997;75:1434-42.9250502
6 Daniel JA, Thomas MG, Powell MR, et al. Methscopolamine bromide blocks hypothalmic-stimulated release of growth hormone in ewes. J Anim Sci 1997;75:1359-62.9159285
7 Bizzarro A, Iannucci F, Tolino A, et al. Inhibiting effect of atropine on prolactin blood levels after stimulation with TRH. Clin Exp Obstet Gynecol 1980;7:108-11.6788407
8 Svennersten K, Nelson L, Juvnäs-Moberg K. Atropinization decreases oxytocin secretion in dairy cows. Acta Physiol Scand 1992;145:193-4.1636447
9 Masala A, Alagna S, Devilla L, et al. Muscarinic receptor blockade by pirenzepine: Effect on prolactin secretion in man. J Endocrinol Invest 1982;5:53-5.6808052

## Substance Identification

### Substance Name

Glycopyrrolate

### CAS Registry Number

596-51-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adjuvants, Anesthesia

Bronchodilator Agents

Muscarinic Antagonists

Parasympatholytics